# Cefoxitin

CASRN: 35607-66-0

## Drug Levels and Effects

### Summary of Use during Lactation

Substantial information indicates that cefoxitin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Combined use of cefoxitin and cefuroxime can alter the milk flora and infant fecal flora.[1] Occasionally, diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefoxitin is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After a 1 gram dose of cefoxitin in one woman, the cefoxitin level in milk 2 hours after the dose was 5.6 mg/L.[2,3]

Four postpartum women received 1 gram of cefoxitin three times a day. Only 8 of 50 breastmilk samples had measurable cefoxitin levels of 0.8 to 1 mg/L. Other samples had unmeasurable (<0.8 mg/L) cefoxitin levels.[4]

Fifteen nursing others received a single intramuscular dose of cefoxitin 1 gram. Cefoxitin was not detected (<0.5 mg/L) in any milk samples taken up to 24 hours after the dose.[5]

After a single 2 gram intramuscular dose of cefoxitin in 5 women, peak milk levels of 0.31 to 0.65 mg/L occurred 1 to 5 hours after the dose.[6]

Cefoxitin was not measurable in breastmilk at any time up to 6 hours after a single 1 gram intravenous dose of cefoxitin in 2 women.[7]

Eighteen women undergoing cesarean section were given either a single 2 gram dose of cefoxitin or 2 g followed by two 1 gram doses (route unspecified). Cefoxitin was detected (detection limit 0.5 mg/L) in the milk of only one woman at a concentration of 0.9 mg/L 19 hours after the third dose of cefoxitin.[8]

Fifteen women were given a single 1 gram dose of cefoxitin intravenously at about 1 month after delivery. The average milk level 2 hours after the dose was 0.05 mg/L.[[9]

Five women were who had been receiving intravenous cefoxitin 1 gram twice daily for 2 days following cesarean section each donated a milk sample. The highest milk concentration was 1.71 mg/L at 1 hour after the dose in one woman. Drug concentrations in samples taken at 1.5 or 2 hours after the dose in 3 women ranged from 0.71 to 0.94 mg/L. A fifth woman who donated a milk sample at 2.5 hours after the dose had a milk cefoxitin concentration of 0.57 mg/L.[10]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Ji C, Zhang G, Xu S, et al. (2022). Antibiotic treatments to mothers during the perinatal period leaving hidden trouble on infants. Eur J Pediatr.
2 Geddes AM, Schnurr LP, Ball AP, et al. (1977). Cefoxitin: A hospital study. Br Med J.
3 Geddes AM, McGhie D, Ball AP, et al. (1978). Studies with cefuroxime and cefoxitin. Scand J Infect Dis Suppl.
4 Santo GH, Huch A. (1979). Ubergang von cefoxitin in muttermilch. Infection.
5 Dubois M, Delapierre D, Chanteux L, et al. (1981). A study of the transplacental transfer and the mammary excretion of cefoxitin in humans. J Clin Pharmacol.
6 Dresse A, Lambotte R, Dubois M, et al. (1983). Transmammary passage of cefoxitin: Additional results. J Clin Pharmacol.
7 Matsuda S. (1984). Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol.
8 Roex AJ, van Loenen AC, Puyenbroek JI, et al. (1987). Secretion of cefoxitin in breast milk following short-term prophylactic adminstration in caesarean secretion. Eur J Obstet Gynecol Reprod Biol.
9 Zhang Y, Zhang Q, Xu Z. (1997). Zhonghua Fu Chan Ke Za Zhi.
10 Kiriazopoulos E, Zaharaki S, Vonaparti A, et al. (2017). Quantification of three beta-lactam antibiotics in breast milk and human plasma by hydrophilic interaction liquid chromatography/positive-ion electrospray ionization mass spectrometry. Drug Test Anal.

## Substance Identification

### Substance Name

Cefoxitin

### CAS Registry Number

35607-66-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins